# Sepiapterin

CASRN: 17094-01-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of sepiapterin during breastfeeding. If a mother requires sepiapterin, it is not a reason to discontinue breastfeeding. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Sapropterin

## Substance Identification

### Substance Name

Sepiapterin

### CAS Registry Number

17094-01-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Coenzymes